# Measles-Mumps-Rubella-Varicella Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to measles, mumps, rubella and varicella virus vaccine. Breastfeeding appears to enhance the immunity retention of the measles vaccine. Breastfed infants have rarely developed varicella rashes after maternal vaccination, but transmission has also occurred in the absence of breastfeeding, so the role of breastfeeding in transmission to infants is not known.[1] Although rubella vaccine virus might be excreted into milk, the virus usually does not infect the infant. If an infection does occur, it is well tolerated because the viruses are attenuated.[2,3] No clear evidence exists of live attenuated measles or mumps vaccine virus excretion into breastmilk.[4] Lack of exclusive breast feeding until 5 months of age is a risk factor for an infant’s poor response to measles vaccination.[5] Breastfed infants should be vaccinated according to the routine recommended schedules.

### Drug Levels

Maternal Levels. No studies have evaluated the effects of the combined measles, mumps, rubella and varicella (MMRV) vaccine during breastfeeding. A study of mothers vaccinated with the Cendehill strain of live, attenuated rubella virus found no transmission of the live virus to their breastfed infants.[6] However, rubella vaccine virus can appear in breastmilk and result in infections in some infants.[7-10]

In a prospective study, 169 mothers with low titers or either measles or rubella were given MR vaccine (Schwarz FF-8 strain/TO-336 strain; Takeda Pharmaceutical Co. Ltd, Osaka, Japan) at their 1-month postnatal checkup. Mothers provided 5 mL of breastmilk 2 weeks later. Rubella virus antigen was not detected in the breastmilk of any mothers. Measles virus RNA was isolated from the breastmilk of 2 vaccinated mothers.[11]

Infant Levels. Relevant published information was not found as of the revision date. Two postpartum women immunized with varicella vaccine provided preimmunization and serial postimmunization breastmilk samples (number not specified). One sample of colostrum contained detectable viral DNA and B-actin by polymerase chain reaction, but all other samples were negative for these species. No varicella gene sequences were found in any of the samples.[12]

One study of 12 women vaccinated with live, attenuated varicella vaccine found no evidence of varicella virus excretion into breastmilk.[13]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,14]

One 12-day-old breastfed infant developed a rubella infection 11 days after maternal vaccination with live rubella vaccine.[15] However, it is questionable if maternal vaccination was the cause of the infant's infection.[16]

Another breastfed infant had live rubella vaccine virus isolated from a throat swab after maternal immunization. The infant did not demonstrate seroconversion or adverse reactions.[7]

Some breastfed infants acquire passive immunity to rubella after maternal vaccination as do infants of mothers with natural rubella immunity. However, neither group of infants had a decreased response to rubella vaccine administered to the infant at 15 to 18 months of age.[8]

After immunization of their mothers with rubella vaccine, 25% of breastfed infants in one study showed transient seroconversion to rubella virus but without any clinical disease.[8]

A 25-day-old otherwise healthy infant developed a rash that was found to be caused by the varicella vaccine strain. The baby’s mother received the varicella vaccine (Varivax, Merck & Co) on day 3 postpartum, when the infant was present in the room. Neither the mother nor any known contact had a rash prior to the infant’s rash. No other known contact had been vaccinated in the 90 days prior to the infant’s presentation at the clinic. The infant was primarily formula-fed but received expressed breastmilk 4 times a day. The authors considered transmission via breastmilk, saliva or respiratory spread unlikely, but possible. The most likely exposure was thought to be via aerosolization at the time of vaccine administration.[17]

In a prospective study of mothers given MR vaccine (Schwarz FF-8 strain/TO-336 strain; Takeda Pharmaceutical Co. Ltd, Osaka, Japan) at their 1-month postnatal checkup, measles virus RNA was isolated from the breastmilk of 2 vaccinated mothers. Neither of their breastfed infants had any clinical disease.[11]

Investigators in Lusaka, Zambia studied 200 children who had received a measles-containing vaccine. Half were HIV positive and half were HIV negative. Forty-five percent of the children were in the 10- to 15-year-old range. Blood samples were collected to determine IgG titer against measles. Children who had been breastfed had one-third the risk of having a low titer than those who had not been breastfed.[18]

A 26-day-old infant presented with a rash that was determined to be caused by varicella vaccine. The infant’s mother had received the vaccine on the first day postpartum and developed erythematous, papular lesions on her scalp, hands, and abdomen on day 21 postpartum. She had breastfed her infant until day 21 when she switched the infant’s feeding to formula. The infant’s lesions developed on day 24 of life. The role of breastfeeding in the development of the infant’s lesions is unclear.[19]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Marin M, Leung J, Gershon AA. Transmission of vaccine-strain varicella-zoster virus: A systematic review. Pediatrics 2019;144:452–3.31471448
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
4 Alain S, Dommergues MA, Jacquard AC, et al. State of the art: Could nursing mothers be vaccinated with attenuated live virus vaccine? Vaccine 2012;30:4921–6.22659446
5 Kumari PL, Kutty AM. Measles specific immunoglobulin G response in children aged 4-12 year who received two doses of measles containing vaccine in infancy. Indian Pediatr 2021;58:250–2.33713061
6 Farquhar JD. Follow-up on rubella vaccinations and experience with subclinical reinfection. J Pediatr 1972;81:460–5.5065683
7 Buimovici-Klein E, Hite RL, Byrne T, et al. Isolation of rubella virus in milk after pospartum immunization. J Pediatr 1977;91:939–41.925824
8 Krogh V, Duffy LC, Wong D, et al. Postpartum immunization with rubella virus vaccine and antibody response in breast-feeding infants. J Lab Clin Med 1989;113:695–9.2732617
9 Losonsky GA, Fishaut JM, Strussenberg J, et al. Effect of immunization against rubella on lactation products. I. Development and characterization of specific immunologic reactivity in breast milk. J Infect Dis 1982;145:654–60.7077089
10 Losonsky GA, Fishaut JM, Strussenberg J, et al. Effect of immunization against rubella on lactation products. II. Maternal-neonatal interactions. J Infect Dis 1982;145:661–6.7077090
11 Hisano M, Kato T, Inoue E, et al. Evaluation of measles-rubella vaccination for mothers in early puerperal phase. Vaccine 2016;34:1208–14.26801065
12 Dolbear GL, Moffat J, Falkner C, et al. A pilot study: Is attenuated varicella virus present in breast milk after postpartum immunization? Obstet Gynecol 2003;101 (4 Suppl):47s. https://journals.lww.com/greenjournal/toc/2003/04001#1229898841
13 Bohlke K, Galil K, Jackson LA, et al. Postpartum varicella vaccination: Is the vaccine virus excreted in breast milk? Obstet Gynecol 2003;102:970–7.14672472
14 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
15 Landes RD, Bass JW, Millunchick EW, et al. Neonatal rubella following postpartum maternal immunization. J Pediatr 1980;97:465–7.7191002
16 Lerman SJ. Neonatal rubella following maternal immunization. J Pediatr 1981;98:668–9.7205504
17 Kluthe M, Herrera A, Blanca H, et al. Neonatal vaccine-strain varicella-zoster virus infection 22 days after maternal postpartum vaccination. Pediatr Infect Dis J 2012;31:977–9.22572750
18 Gardner PN, Hangoma J, Sialubanje C, et al. Factors associated with measles vaccine immunogenicity in children at University Teaching Hospitals, Lusaka, Zambia. PLOS Glob Public Health 2025;5:e0003954.40267112
19 Saringkarisate K, Len KA, Melish ME, et al. Vaccine-strain varicella virus transmitted to a term infant following maternal postpartum vaccination. J Pediatric Infect Dis Soc 2022;11:452–3.35751631

## Substance Identification

### Substance Name

Measles-Mumps-Rubella-Varicella Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines